# Selegiline

CASRN: 14611-51-9

## Drug Levels and Effects

### Summary of Use during Lactation

A minimal amount of clinical use of selegiline during breastfeeding has been reported. Although no adverse reactions have been reported in the breastfed infants, an alternate drug may be preferred, especially while nursing a newborn or preterm infant. The manufacturer of the selegiline transdermal patch recommends that breastfeeding is not recommended during treatment and for 7 days after the final dose.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. A woman with severe depression used a selegiline patch 6 mg per day during pregnancy and postpartum. She exclusively breastfed her infant. A blood sample taken from the infant on day 12 postpartum found no selegiline or its metabolite in the infant’s plasma. No details were provided regarding the assay or its detection limits.[1]

### Effects in Breastfed Infants

A woman took selegiline 10 mg, levodopa 400 mg and benserazide 100 mg daily throughout pregnancy and continued them while breastfeeding her infant for 3 days. The child was followed for 10 years and no developmental abnormalities were found.[2]

A woman with severe depression used a selegiline patch 6 mg per day during pregnancy and postpartum. She exclusively breastfed her infant for an unstated period of time. Pediatric follow-up at 5 months of age found that the infant was developing normally.[1]

### Effects on Lactation and Breastmilk

Selegiline can decrease serum prolactin in women with migraine,[3] and in those taking neuroleptic drugs.[4,5] The clinical relevance of these findings in nursing mothers is not known. The prolactin level in a mother with established lactation may not affect her ability to breastfeed.

### References

1 Bauer RL, Orfei J, Wichman CL. (2017). Use of transdermal selegiline in pregnancy and lactation: A case report. Psychosomatics.
2 Kupsch A, Oertel WH. (1998). Selegiline, pregnancy, and Parkinson's disease. Mov Disord.
3 Calabresi P, Silvestrini M, Stratta F, et al. (1993). l-Deprenyl test in migraine: Neuroendocrinological aspects. Cephalalgia.
4 Perényi A, Bagdy G, Arató M. (1983). An early phase II trial with L-deprenyl for the treatment of neuroleptic-induced parkinsonism. Pharmacopsychiatria.
5 Kodesh A, Weizman A, Aizenberg D, et al. (2003). Selegiline in the treatment of sexual dysfunction in schizophrenic patients maintained on neuroleptics: a pilot study. Clin Neuropharmacol.

## Substance Identification

### Substance Name

Selegiline

### CAS Registry Number

14611-51-9

### Drug Class

Breast Feeding

Lactation

Antiparkinson Agents

Monoamine Oxidase Inhibitors

Neuroprotective Agents